# Chlorpropamide

CASRN: 94-20-2

## Drug Levels and Effects

### Summary of Use during Lactation

Chlorpropamide is no longer marketed in the United States. Limited data indicate that amounts of chlorpropamide in breastmilk are unlikely to affect a breastfed infant. Short-acting drugs are generally preferred while breastfeeding a neonate to avoid drug accumulation. Monitor breastfed infants for signs of hypoglycemia such as jitteriness, excessive sleepiness, poor feeding, seizures cyanosis, apnea, or hypothermia. If there is concern, monitoring of the breastfed infant's blood glucose is advisable during maternal therapy with hypoglycemic agents.[1,2]

### Drug Levels

Maternal Levels. No studies on the excretion of chlorpropamide into breastmilk have been published. The manufacturer states that a level of 5 mg/L was found in breastmilk 5 hours after a 500 mg dose; however, no study details were given.[1,3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acarbose (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1/), Colesevelam (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM516/), Glipizide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM127/), Glyburide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM128/), Insulin (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM147/), Metformin (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM173/), Miglitol (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM407/), Semaglutide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/), Tirzepatide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/)

### References

1 Everett JA. Use of oral antidiabetic agents during breastfeeding. J Hum Lact 1997;13:319-21.9429368
2 Berlin CM, Briggs GG. Drugs and chemicals in human milk. Semin Fetal Neonatal Med 2005;10:149-59.15701580
3 Briggs GG, Freeman RK, Towers CV, Forinash AB. Drugs in pregnancy and lactation, 11th ed. Philadelphia. Wolters Kluwer. 2017.

## Substance Identification

### Substance Name

Chlorpropamide

### CAS Registry Number

94-20-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypoglycemic Agents

Sulfonylurea Compounds